# Sodium Iodide I 123

CASRN: 41927-88-2

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of sodium iodide I 123 as a diagnostic agent. A US Nuclear Regulatory Commission subcommittee and the American Thyroid Association recommend discontinuation of breastfeeding for 3 to 4 days after a diagnostic scan.[1,2] and UK authorities recommend a cessation of 42 hours after a 20 MBq dose.[3] These values assume no contamination with I 124 or I 125, which has been reported in the past.[4] The safest course of action may be to have breastmilk tested at a nuclear medicine facility at a hospital. When the radioactivity is at a safe level the mother may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[5] Mothers who receive a dose less than 400 MBq for a thyroid scan need not refrain from close contact with their infants.[6]

### Drug Levels

I 123 is a gamma emitter with a principal photon energy of 159 keV and a physical half-life of 13.1 hours.[1] Iodide is actively secreted into breastmilk by the NaI symporter, which is stimulated by lactation, and actively taken up by the mother's and infant's thyroid glands.[7] The maximum effective half-life of I 123 is 10.4 hours.[3]

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hyperthyroidism Diagnosis) Sodium Pertechnetate Tc 99m

### References

1 Dilsizian V, Metter D, Palestro C, et al. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
2 Korevaar TIM, Leung AM, Alexander EK, et al. American Thyroid Association 2026 Guidelines for Thyroid Disease in Preconception, Pregnancy, and Postpartum. Thyroid 2026;36:481–544.42219800
3 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020 https://www.gov.uk/government/publications/arsac-notes-for-guidance
4 Stabin MG. Doses from medical radiation sources. https://hps.org/hpspublications/articles/dosesfrommedicalradiation.html. Accessed Nov 6, 2024.
5 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863–73.10809203
6 Mountford PJ, O'Doherty MJ. Exposure of critical groups to nuclear medicine patients. Appl Radiat Isot 1999;50:89–111.10028630
7 Ramesh S, Basu S. Differential physiological sodium iodide symporter expression in lactating breasts. J Assoc Physicians India 2022;70:11–2.36082732

## Substance Identification

### Substance Name

Sodium Iodide I 123

### CAS Registry Number

41927-88-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Iodine Radioisotopes

Diagnostic Agents